# Saccharin

CASRN: 81-07-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of saccharin in breastmilk, amounts ingested by the infant after typical maternal intake are small and would not be expected to cause any adverse effects in breastfed infants and not likely to reach an intake greater than the acceptable daily intake.[1] Ingestion of diet drinks containing low-calorie sweeteners might increase the risk of vomiting in breastfed infants. However, some authors suggest that women may wish to limit the consumption of nonnutritive sweeteners while breastfeeding because their effect on the nursing infants are unknown.[2,3]

### Drug Levels

Maternal Levels. Six lactating women were given 126 mg of saccharin in the form of a 356 mL (12 fluidounces) soft drink every 6 hours for 9 doses. Plasma and breastmilk were sampled at 9 time points between 0 and 6 hours after the first and ninth doses. The peak milk concentration occurred 2 hours after both the first and ninth doses. Milk concentrations varied widely, ranging from <0.2 to 1.06 mg/L after the first dose up to as high as 1.8 mg/L after the ninth dose. The area under the milk concentration-time curve increased from 54% to 72% of the simultaneous serum concentration-time curve between the first and ninth doses, indicating some accumulation in milk over time. The average elimination half-life from milk was 15 hours on day 1 and 18 hours on day 3, although individual values varied widely.[4] Using the highest milk concentration in this study of 1.8 mg/L, an exclusively breastfed infant would receive a dose of 0.27 mg/kg daily which is much lower than the 5 mg/kg daily limit suggested by the United States Food and Drug Administration.

Twenty lactating women completed background questionnaires about breastfeeding and the intake of nonnutritive sweeteners in the prior 24 hours. Each then donated a milk sample that was analyzed for the presence of nonnutritive sweeteners. Sweetener intake was primarily from diet sodas and sweetener packets. Of the 14 women who reported intake of a nonnutritive sweetener, 4 had saccharin detectable in their breastmilk in concentrations ranging from 0.01 to 1.42 mg/L.[2]

Forty-nine women consumed a beverage containing 20 mg of saccharin. Normal and overweight women were about equally represented in the sample. Breastmilk samples were collected before the beverage and at 30, 60, 120, 180, 240, 300, and 360 minutes after the beverage. The average peak milk level in 46 of the women was 81.5 mcg/L and it occurred at 4 hours after the beverage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cross-sectional survey assessed the dietary history of US mothers nursing infants between 11 and 15 weeks of age. The survey was used to estimate the amount of diet soda and fruit drinks consumed by the women. There were no statistically significant differences in infants’ weight or z-scores based on low calorie sweetener exposure. However, infants exposed to low calorie sweetener in milk once or less per week had a statistically significantly higher risk of vomiting than those who were not exposed. Greater exposure was not associated with vomiting. It was not possible to assess the effects of specific sweeteners.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspartame

### References

1 Bailón Uriza R, Ayala Méndez JA, Cavagnari BM, et al. Non-caloric sweeteners in women of reproductive age - A consensus document. Nutr Hosp 2020;37:211-22.31960692
2 Sylvetsky AC, Gardner AL, Bauman V, et al. Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A 2015;78:1029-32.26267522
3 Rother KI, Sylvetsky AC, Schiffman SS. Non-nutritive sweeteners in breast milk: Perspective on potential implications of recent findings. Arch Toxicol 2015;89:2169-71.26462668
4 Egan PC, Marx CM, Heyl PS, et al. Saccharin excretion in mature human milk. Drug Intell Clin Pharm 1984;18:511.
5 Stampe S, Leth-Møller M, Greibe E, et al. Artificial sweeteners in breast milk: A clinical investigation with a kinetic perspective. Nutrients 2022;14:2635.35807817
6 Huang Q, Murphy J, Smith ER, et al. Diet beverage intake during lactation and associations with infant outcomes in the infant feeding practices study II. Nutrients 2021;13:3154.34579031

## Substance Identification

### Substance Name

Saccharin

### CAS Registry Number

81-07-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Artificial Sweeteners

Sweetening Agents